# Trypan Blue

CASRN: 72-57-1

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the clinical use of trypan blue during breastfeeding. Breastfeeding is not expected to result in exposure of the child to trypan blue due to the negligible systemic exposure of trypan blue in humans following injection and subsequent removal of the drug at the completion of surgical procedures.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

## Substance Identification

### Substance Name

Trypan Blue

### CAS Registry Number

72-57-1

### Drug Class

Breast Feeding

Lactation

Milk, Human

Azo Compounds